# Drugs and Lactation Database (LactMed) – Glossary

Absorption: The passage of a chemical or drug across the tissue of the gastrointestinal tract into the bloodstream that goes to the liver, where it may undergo metabolism before entry into the general circulation of the bloodstream.
Bioavailability: The extent to which a chemical or drug crosses the tissue of the gastrointestinal tract and through the liver, and enters the general circulation of the bloodstream either as active drug or metabolite(s).
Colostrum: Breast fluid that is secreted during the first few days after birth, before the onset of mature milk.
Concentration: The amount of a substance in a given volume of body fluid. The same as Level.
Ductus Arteriosus: A blood vessel that connects the left pulmonary artery and the aorta of the fetus.
Exclusive Breastfeeding: Feeding an infant with breastmilk alone, with no other intake, with the exception of prescribed medications and vitamins. According to the American Academy of Pediatrics and the World Health Organization, breastfeeding should be exclusive for the first six months of the baby's life.
Excretion: The elimination of a chemical or drug from the body, usually by the kidneys, either as unchanged drug or its metabolite(s).
Expressed Milk: Milk that is extracted from the breast by means other than nursing, such as by hand or using a breast pump.
Foremilk: The first milk that is excreted from the breast at the beginning of a nursing bout or at the beginning of expression. It is relatively low in fat.
Galactagogue: Medications or other substances believed to assist initiation, maintenance, or augmentation of the rate of maternal milk synthesis.
Galactorrhea: Abnormal production of milk in nonpregnant, nonlactating women or in men.
Gram (g): A unit of weight equal to about one-thirtieth of an ounce.
Half-life: The time required for one-half of the total concentration of a chemical or drug in a body fluid, usually the general bloodstream, to be eliminated. It takes two half-lives for 75% of a drug to be eliminated and 5 half-lives for 97% of a drug to be eliminated.
Hindmilk: The last milk that is excreted from the breast at the end of a nursing bout or at the end of expression. It is relatively high in fat compared to foremilk.
Infant: A young child, from birth through one year of age.
In Utero: Within the uterus.
Kilogram (kg): A unit of weight equal to 1,000 grams or about 2.2 pounds.
Lactation: The normal secretion of milk by the breast following pregnancy.
Level: The amount of a substance in a given volume of body fluid. The same as Concentration.
Liter (L): A volume of liquid equal to about 1.05 quarts.
Metabolism: The process of the body's breaking down one chemical or drug into another. Metabolism changes a substance into active or inactive metabolite(s).
Metabolite: A chemical or drug that is formed by the actions of the body, usually the liver, on the parent compound. The metabolite may be inactive or have activity that is the same or different from the parent substance.
Microgram (mcg): One-millionth of a gram.
Milligram (mg): One-thousandth of a gram.
Milliliter (mL): One-thousandth of a liter of liquid.
Neonate: An infant of 28 days of age or less. Same as a Newborn.
Newborn: An infant of 28 days of age or less. Same as a Neonate.
Parent compound: The original chemical or drug that is taken by the mother.
Peak: The highest concentration of a chemical, drug or metabolite within a body fluid.
Plasma: The fluid portion of the blood which contains no red or white blood cells.
Postpartum: The time right after delivery of an infant.
Prenatal: Before birth.
Preterm: Delivery of an infant prior to the 37th week of gestation.
Prodrug: A drug that is inactive when taken and then metabolized in the body to an active drug.
Prolactin: A hormone produced by the pituitary gland that stimulates milk production.
Relative Infant Dosage (RID): The dosage of a drug in mg/kg that the infant receives divided by the dosage of the drug that the mother received in mg/kg, multiplied by 100. Same as the Weight-adjusted Percentage of Maternal Dosage.
Serum: The clear fluid portion of the blood which contains no red or white blood cells or blood platelets.
Steady-state: The time at which the concentration of a substance remains constant (such as in blood), because the rate of drug administration equals the rate of drug elimination from the body.
Trough: The lowest concentration of a chemical, drug or metabolite within in a body fluid.
Weight-adjusted Dosage: The dosage of a drug divided by the weight of the individual.
Weight-adjusted Percentage of Maternal Dosage: The dosage of a drug in mg/kg that the infant receives divided by the dosage of the drug that the mother received in mg/kg, multiplied by 100. Same as the relative infant dosage.